# Perfluorohexyloctane

CASRN: 133331-77-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of perfluorohexyloctane during breastfeeding. Because perfluorohexyloctane is poorly absorbed, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Perfluorohexyloctane

### CAS Registry Number

133331-77-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Fluorocarbons